# Evening Primrose

CASRN: 308064-97-3

## Drug Levels and Effects

### Summary of Use during Lactation

Evening primrose (Oenothera biennis) seed oil contains gamma-linolenic acid (GLA). Oral evening primrose oil (EPO) has been used to treat Raynaud’s phenomenon of the nipple in nursing mothers. It is also used for premenstrual syndrome, cyclical mastalgia, and atopic dermatitis. Supplementation of nursing mothers with EPO increases the breastmilk content of linoleic acid and total GLA plus its metabolite, Duomo-gamma-linolenic acid, and caused no adverse reactions in the breastfed infants.[1] Supplementation of mothers with GLA had no effect on the development of atopic dermatitis in their breastfed infants.[2] Evening primrose oil is "generally recognized as safe" (GRAS) as a food by the U.S. Food and Drug Administration.

Heating breastmilk to 63.5 degrees C reduces the concentration of linolenic acid by about 22%. Freezing milk at -20 degrees C and thawing more than once decreases linolenic acid concentration by an average of 63%.[3] Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Thirty-six nursing mothers who were 2 to 6 months postpartum took either 2 grams of evening primrose oil (Efamol; n = 18) or placebo (n = 18) twice daily. The total daily intake of the treated mothers was 2.8 grams of linoleic acid and 320 mg of GLA. Samples of milk were taken on entry to the study and after 8 months of supplementation. Breastmilk of supplemented mothers contained more linoleic acid and total GLA plus its metabolite, dihomo-gamma-linolenic acid, than at baseline. Mothers who received placebo had no changes from baseline.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Eighteen nursing mothers took EPO 2 grams daily for 8 months starting at an average of 3.4 months postpartum. After 8 months of supplementation, no adverse reactions were reported in their breastfed infants.[1]

### Effects on Lactation and Breastmilk

Supplementation of nursing mothers with EPO for 8 months increased the breastmilk content of linoleic acid and total GLA plus its metabolite, dihomo-gamma-linolenic acid, and caused no adverse reactions in the breastfed infants.[1]

Evening primrose oil purportedly is effective in treating Raynaud’s phenomenon of the nipple, but it may not provide immediate relief.[4] Adequate studies are lacking, however.

### References

1 Cant A, Shay J, Horrobin DF. (1991). The effect of maternal supplementation with linoleic and gamma-linolenic acids on the fat composition and content of human milk: a placebo-controlled trial. J Nutr Sci Vitaminol (Tokyo).
2 Kitz R, Rose MA, Schonborn H, et al. (2006). Impact of early dietary gamma-linolenic acid supplementation on atopic eczema in infancy. Pediatr Allergy Immunol.
3 Wardell JM, Hill CM, D'Souza SW. (1981). Effect of pasteurization and of freezing and thawing human milk on its triglyceride content. Acta Paediatr Scand.
4 Anderson JE, Held N, Wright K. (2004). Raynaud's phenomenon of the nipple: A treatable cause of painful breastfeeding. Pediatrics.

## Substance Identification

### Substance Name

Evening Primrose

### Scientific Name

Oenothera biennis

### CAS Registry Number

308064-97-3

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Oils

Phytotherapy

Plants, Medicinal